# Sucralfate

CASRN: 54182-58-0

## Drug Levels and Effects

### Summary of Use during Lactation

No data are available on sucralfate use during breastfeeding; however, it is virtually unabsorbed orally. Most authorities consider sucralfate acceptable to use during breastfeeding.[1-4] No special precautions are required, including following application to the nipples in a skin cream.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

A study of mother with cracked nipples compared the effects of soft paraffin (petrolatum) (n = 47) to a commercial cream containing sucralfate, zinc and copper (Cicalfate-Avene, France) (n = 68). Reduction of nipple cracking judged by a blinded dermatologist was 3.3 to 5.3 times greater in the sucralfate group compared to the petrolatum group.[5]

### Alternate Drugs to Consider

Antacids, Cimetidine, Famotidine, Omeprazole, Pantoprazole

### References

1 Lewis JH, Weingold AB, Committee of FDA-Related Matters American College of Gastroenterology. (1985). The use of gastrointestinal drugs during pregnancy and lactation. Am J Gastroenterol.
2 Hagemann TM. (1998). Gastrointestinal medications and breastfeeding. J Hum Lact.
3 Broussard CN, Richter JE. (1998). Treating gastro-oesophageal reflux disease during pregnancy and lactation: What are the safest therapy options?. Drug Saf.
4 Richter JE. (2005). Review article: The management of heartburn in pregnancy. Aliment Pharmacol Ther.
5 Talaee R, Mohammadzadeh M, Rahimi H. (2021). Comparing the combination of copper, zinc, and sucralfate (Cicalfate®) with white soft paraffin in the treatment of cracked nipples. Iran J Dermatol.

## Substance Identification

### Substance Name

Sucralfate

### CAS Registry Number

54182-58-0

### Drug Class

Breast Feeding

Lactation

Anti-Ulcer Agents

Gastrointestinal Agents